# Ustekinumab

CASRN: 815610-63-0

## Drug Levels and Effects

### Summary of Use during Lactation

Ustekinumab is usually either not detectable or detectable at very low levels in breastmilk. It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[1] Many infants have been safely breastfed during maternal treatment with ustekinumab. Waiting for at least 2 weeks postpartum to resume therapy suspended during pregnancy may minimize transfer to the infant.[2] Numerous experts and professional guidelines have stated that the drug is a low risk to the nursing infant and acceptable to use during breastfeeding.[3-11]

### Drug Levels

Maternal Levels. In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 6 women receiving ustekinumab provided milk samples at 1, 12, 24, and 48 hours after drug administration. Some also provided samples at 72, 96, 120, and 168 hours after drug administration. Four of the women had detectable (>0.01 mg/L) ustekinumab levels in milk. Peak concentrations in breastmilk ranged from 0.72 to 1.57 mg/L and occurred at 12 to 72 hours after the dose. Only 3 of the women had a detectable concentration in milk beyond 48 hours.[12]

A woman with treatment-refractory Crohn’s disease was treated during pregnancy with ustekinumab until the third trimester. It was reinitiated 7 weeks postpartum with a loading dose of 390 mg intravenously, then 90 mg every 8 weeks. A breastmilk sample taken 16 weeks after the dose was 3.2 mg/L. After the third dose, breastmilk levels of ustekinumab were 0.82 mg/L within the first day after the dose, 0.18 mg/L at 3 weeks after the third dose and 0.16 mg/L at 4 weeks after the third dose.[13]

Three mothers taking ustekinumab for Crohn’s disease had breastmilk levels of ustekinumab measured 1 hour after a dose and sequentially for up to 2 weeks after the dose. In one patient who was receiving a dose of 90 mg every 4 weeks, the trough milk sample contained 43 mcg/L of ustekinumab and attained a peak level of 43.1 mcg/L two days after the dose. The milk level dropped to 16.7 mcg/L at 4 days after the dose, then rose again to 26.3 mcg/L at 5 days after the dose. The other two women were receiving a dosage of 90 mg every 8 weeks. One had a trough ustekinumab milk level of 40 mcg/L. After the dose, the milk level gradually rose to a level of 45.1 mcg/L at 6 days after the dose. The third woman, who had not had any doses during pregnancy, had a trough milk value of 3 mcg/L. It rose to a peak of 7.4 mcg/L on day 3 and then plateaued between 5.4 and 6.6 mcg/L on days 4 to 6 after the dose.[14]

A pregnant woman with ulcerative colitis received ustekinumab 90 mg 4 times during pregnancy with the last dose at 29 weeks gestation She was also treated with mesalamine 4.8 grams daily during pregnancy and lactation. Postpartum, amlodipine 10 mg daily was begun for hypertension and at 5 days postpartum ampicillin-sulbactam was begun intravenously for suspected endometritis. Subcutaneous ustekinumab was restarted at 48 days postpartum and first detected in milk on day 49 at 1.5 mcg/L. On day 57, the milk concentration was 13.6 mcg/L. Milk concentrations then declined to 10.8, 7.9 and 3.4 mcg/L on days 64, 71 and 78 postpartum, respectively.[15]

Five patients with inflammatory bowel disease were receiving ustekinumab, 4 for maintenance and 1 for induction intravenously. They had been breastfeeding for 6 to 11 months. After 90 mg subcutaneously, ustekinumab appeared in milk within 0 to 2 days, peaking at day 4 to 12 at 9.8 to 31.6 mcg/L. Following 520 ustekinumab intravenously, levels were higher with a peak of 105.3 mcg/L on day 8 and remained detectable throughout the 15-day sampling period. The estimated maximum daily infant dose ranged from 1.5 to 4.7 mcg/kg after subcutaneous injection and was 15.8 mcg/kg after intravenous injection.[16]

Infant Levels. Sixty-nine breastfed infants were born to mothers who received ustekinumab during pregnancy and postpartum. The estimated mean half-life of ustekinumab in infants was 23.2 days (95% CI 21.5 to 24.9 days).[17]

Five patients with inflammatory bowel disease were receiving ustekinumab, 4 for maintenance and 1 for induction intravenously. All infants were exposed to ustekinumab in utero and during breastfeeding. In cases 2 to 5, ustekinumab was cleared from infant serum despite ongoing breastfeeding. Infants 3 and 4 had undetectable levels by 3 months. Infants 2 and 5 had low levels at 3 months, and undetectable levels at 6 months. Infant 1 was not assessed.[6]

### Effects in Breastfed Infants

One woman receiving ustekinumab for severe psoriasis breastfed her infant. No adverse effects were reported in the infant, although the dosage of ustekinumab and the extent of breastfeeding were not reported.[18]

In a multi-center study of women with inflammatory bowel disease in pregnancy (the PIANO registry), 6 women received a ustekinumab while breastfeeding their infants. Among those who received ustekinumab or another biologic agent while breastfeeding, infant growth, development or infection rate was no different from infants whose mothers received no treatment. An additional 68 women received a biologic agent plus a thiopurine. Infant outcomes were similar in this group.[12]

A woman with treatment-refractory Crohn’s disease was treated during pregnancy with ustekinumab until the third trimester. It was reinitiated 7 weeks postpartum with a loading dose of 390 mg intravenously, then 90 mg every 8 weeks. She breastfed her infant (extent and duration not reported). Follow-up of the infant at 12 months of age was normal.[13]

A woman with severe psoriasis was treated with ustekinumab 45 mg subcutaneously every 12 weeks until pregnancy was confirmed. After delivery ustekinumab was restarted while she was breastfeeding (extent and duration not stated). The infant reportedly had no complications and a normal growth curve.[19]

Three mothers taking ustekinumab for Crohn’s disease breastfed (extent not stated) their infants. Their dosages were 90 mg every 4 weeks in one and 90 mg every 8 weeks in the other two. Infants were followed for 3 to 6 months and no developmental delays or excess infections of hospital admissions were noted.[14]

A pregnant woman with ulcerative colitis received ustekinumab 90 mg 4 times during pregnancy with the last dose at 29 weeks gestation. She was also treated with mesalamine 4.8 grams daily during pregnancy and lactation. Postpartum, amlodipine 10 mg daily was begun for hypertension and at 5 days postpartum ampicillin-sulbactam was begun intravenously for suspected endometritis. Subcutaneous ustekinumab was restarted at 7 weeks postpartum. The infant was partially (>50%) breastfed for 3 months. The infant had no adverse drug events at the 1 and 3-month checkups and received routine infant vaccinations with no adverse events.[15]

The DUMBO registry in Spain followed 526 newborns whose mothers had inflammatory bowel disease. During breastfeeding 4% of the mothers were receiving ustekinumab. Of children breastfed at least until month 6 and whose mothers were taking a biologic, 60% received the first and second dose of rotavirus vaccine, and 17% the 3rd dose. Of children breastfed at least until month 12 and whose mothers were taking a biologic, 97% received the first dose of MMR vaccine; and from children breastfed at least until month 15 and whose mothers were under biologics, 84% received the first dose of varicella vaccine. No serious adverse events related to live vaccines were reported.[20]

In a prospective multicenter study, 20 infants were born to mothers taking ustekinumab during pregnancy. Of these, 18 were breastfed for a median of 7 months (range 0.5 to 27 months). Infants were followed for at least 6 months and a median of 18 months. All children had normal growth and normal psychomotor development. All but one child exposed to ustekinumab receive mandatory vaccinations with non-live vaccines without any serious or unexpected adverse events.[21]

A multicenter study in Spain prospectively followed women treated for inflammatory bowel disease with biological agents, mostly anti-TNF agents. Overall, 29% of infants exposed to a biologic agent were also exposed to azathioprine or mercaptopurine and almost all were exposed during both pregnancy and lactation. Twelve infants were exposed to ustekinumab during lactation for a mean duration of 39.5 weeks. No adverse impact of biologics exposure was found on the psychomotor development of infants for up to 1 year of age.[22]

Five nursing mothers with inflammatory bowel disease were receiving ustekinumab, 4 for maintenance and 1 for induction intravenously. No adverse events were reported in the nursing infants at 4.6 to 6.7 years of age. No serious infections occurred. All infants completed the Danish National Immunization Program, including the live-attenuated measles, mumps, and rubella (MMR) vaccine without adverse effects at 15 months and 4 years. All mothers reported age-appropriate infant development at 4 to 6 years. ASQ-3 scores at 12 months showed no deviations from the reference population across 5 developmental domains, except higher gross motor scores, among ustekinumab-exposed infants.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
2 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
3 Smith CH, Yiu ZZN, Bale T, . British Association of Dermatologists guidelines for biologic therapy for psoriasis 2020: A rapid update. Br J Dermatol 2020;183:628-37.32189327
4 Mahadevan U, Robinson C, Bernasko N, . Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508-24.30658060
5 Sammaritano LR, Bermas BL, Chakravarty EE, . 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56.32090480
6 Yeung J, Gooderham MJ, Grewal P, . Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S-14S.
7 Russell MD, Dey M, Flint J, . British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48-e88.36318966
8 Torres J, Chaparro M, Julsgaard M, . European Crohn’s and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1-27.36005814
9 Rüegg L, Pluma A, Hamroun S, . EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910-26.40287311
10 Laube R, Selinger CP, Seow CH, . Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040-53.36944479
11 Mahadevan U, Seow CH, Barnes EL, . Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1-S60.40874901
12 Matro R, Martin CF, Wolf D, . Exposure concentrations of infants breastfed by women receiving biologic therapies for inflammatory bowel diseases and effects of breastfeeding on infections and development. Gastroenterology 2018;155:696-704.29857090
13 Klenske E, Osaba L, Nagore D, . Drug levels in the maternal serum, cord blood and breast milk of a ustekinumab-treated patient with Crohn’s disease. J Crohns Colitis 2019;13:267-9.30388211
14 Bar-Gil Shitrit A, Ben-Horin S, Mishael T, . Detection of ustekinumab in breast milk of nursing mothers with Crohn disease. Inflamm Bowel Dis 2021;27:742-5.33386732
15 Saito J, Kaneko K, Kawasaki H, . Ustekinumab during pregnancy and lactation: Drug levels in maternal serum, cord blood, breast milk, and infant serum. J Pharm Health Care Sci 2022;8:18.35773736
16 Balmer C, Anderson PO, Korgaard J, . Ustekinumab use in lactation: Drug pharmacokinetics and normal development in exposed infants. Inflamm Bowel Dis 2026;32:1192-6.41578449
17 Julsgaard M, Wieringa JW, Baunwall SMD, . Infant ustekinumab clearance, risk of infection, and development after exposure during pregnancy. Clin Gastroenterol Hepatol 2025;23:134-43.38278191
18 Lund T, Thomsen SF. Use of TNF-inhibitors and ustekinumab for psoriasis during pregnancy: A patient series. Dermatol Ther 2017;30:e12454.
19 Mugheddu C, Atzori L, Lappi A, . Biologics exposure during pregnancy and breastfeeding in a psoriasis patient. Dermatol Ther 2019;32:e12895.30958637
20 Chaparro Sanchez M, García Donday M, Rubio S, . Live vaccines in children exposed to biological agents for IBD in utero and/or during breastfeeding: Are they safe? Results from the Dumbo registry of GETECCU. United European Gastroenterol J 2022;10:757-8. doi:10.1002/ueg2.12295
21 Mitrova K, Pipek B, Bortlik M, . Safety of ustekinumab and vedolizumab during pregnancy-pregnancy, neonatal, and infant outcome: A prospective multicentre study. J Crohns Colitis 2022;16:1808-15.35708729
22 Palomino L, Rodríguez-Belvís MV, Casanova MJ, . Psychomotor development in infants following maternal exposure to biologics: Results from the DUMBO registry. Clin Gastroenterol Hepatol 2026;24:1688-701.40518059

## Substance Identification

### Substance Name

Ustekinumab

### CAS Registry Number

815610-63-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Dermatologic Agents